# Fact Sheet. Drugs and Lactation Database (LactMed^®^)

LactMed is a database of drugs and other chemicals to which breastfeeding mothers may be exposed. It includes information on the levels of such substances in breast milk and infant blood, and the possible adverse effects in the nursing infant. Suggested therapeutic alternatives to those drugs are provided, where appropriate. All data are derived from the scientific literature and fully referenced. Data are organized into substance-specific records, which provide a summary of the pertinent reported information and include links to other NLM databases. Supplemental links to breastfeeding resources from credible organizations are also provided.

## Web Access/Searching

LactMed is accessible, free of charge, via NCBI’s Bookshelf at: https://www.ncbi.nlm.nih.gov/books/NBK501922/

Users can search by drug or chemical name, [underlined: Chemical Abstracts Service] (http://info.cas.org/) Registry Number (RN), pharmacologic category, and/or subject terms. Search results can easily be viewed, printed or downloaded. Search results are displayed in relevancy ranked order, but may be sorted by publication date, author or title.